# Nitroprusside

CASRN: 15078-28-1

## Drug Levels and Effects

### Summary of Use during Lactation

Breastmilk levels of nitroprusside sodium have not been measured after exogenous administration. Because of its short half-life of 2 minutes, it is unlikely to appear in breastmilk. However, its toxic metabolite, thiocyanate, is excreted into milk and can be directly toxic to the infant as well as inhibiting iodide transport into breastmilk. Cyanide is another toxic metabolite of nitroprusside that may enter breastmilk. An alternate drug is therefore preferred during breastfeeding. If use of nitroprusside sodium is unavoidable, the mother should refrain from breastfeeding.

### Drug Levels

Nitroprusside is converted with a half-life of about 2 minutes to cyanide and then to thiocyanate in the body. Both of these metabolites have longer half-lives: 7.3 hours for cyanide and an estimated 3 days to 2 weeks for thiocyanate.[1]

Maternal Levels. An older study found that thiocyanate passed into human breastmilk in concentrations from 27% to 50% of maternal serum levels.[2] A later study found milk levels to range from 16% to 42% of maternal plasma levels.[3] A 2004 study found values ranging from 42% to 82%,[1] while a more recent study reported fractional excretion of thiocyanate that ranged between 1.4-14.4%.[4]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Several studies have found that breastmilk iodine levels are inversely related to the mothers' blood thiocyanate levels, probably through inhibition of the Na/I symporter by thiocyanate.[5-8] However, a recent study failed to demonstrate such a correlation. The authors felt that the effect of thiocyanate on iodine transport may be less pronounced than previously reported.[4] These low breastmilk iodine levels might pose a risk of hypothyroidism to breastfed infants whose mothers have low iodine intake.[4-8]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Candesartan, Benazepril, Captopril, Enalapril, Lisinopril, Quinapril, Hydralazine, Hydrochlorothiazide, Methyldopa, Propranolol

### References

1 Dorea JG. Maternal thiocyanate and thyroid status during breast-feeding. J Am Coll Nutr 2004;23:97-101.15047674
2 Funderburk CF, Van Middlesworth L. Effect of lactation and perchlorate on thiocyanate metabolism. Am J Physiol 1967;213:1371-7.4294711
3 Meberg A, Sande H, Foss OP, et al. Smoking during pregnancy--effects on the fetus and on thiocyanate levels in mother and baby. Acta Paediatr Scand 1979;68:547-52.463536
4 Dasgupta PK, Kirk AB, Dyke JV, et al. Intake of iodine and perchlorate and excretion in human milk. Environ Sci Technol 2008;42:8115-21.19031911
5 Vanderpas J, Rivera MT, Berquist H, et al. Thiocyanate overload decreases iodine supply in iodine-deficient breast-fed infants. Horm Res 2007;68 (Suppl. 3):53-4.17228181
6 Leung AM, Braverman LE, He X, et al. Environmental perchlorate and thiocyanate exposures and infant serum thyroid function. Thyroid 2012;22:938-43.22827469
7 Laurberg P, Nohr SB, Pedersen KM, et al. Iodine nutrition in breast-fed infants is impaired by maternal smoking. J Clin Endocrinol Metab 2004;89:181-7.14715847
8 Kirk AB, Dyke JV, Martin CF, et al. Temporal patterns in perchlorate, thiocyanate, and iodide excretion in human milk. Environ Health Perspect 2007;115:182-6.17384762

## Substance Identification

### Substance Name

Nitroprusside

### CAS Registry Number

15078-28-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Vasodilator Agents